# Cefdinir

CASRN: 91832-40-5

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Although no information is available on the use of cefdinir during breastfeeding, cephalosporins are generally not be expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Cefdinir is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ceftibuten

## Substance Identification

### Substance Name

Cefdinir

### CAS Registry Number

91832-40-5

### Drug Class

- Breast Feeding
- Lactation
- Anti-Infective Agents
- Antibacterial Agents
- Cephalosporins